# Efavirenz

CASRN: 154635-17-3

## Drug Levels and Effects

### Summary of Use during Lactation

Efavirenz is excreted into breastmilk and small amounts are found in the serum of some infants. Treatment of mothers of HIV-positive mothers with efavirenz does not appear to affect growth and development of their HIV-negative breastfed infants. Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[1,2]

### Drug Levels

Maternal Levels. Thirteen mothers who averaged 15.8 weeks (range 6 to 25 weeks) postpartum were treated with efavirenz 600 mg daily plus zidovudine and lamivudine. Milk and plasma samples were taken 3 to 4 hours after the last dose. Skimmed breastmilk efavirenz concentrations averaged 3.5 mg/L (range 1.3 to 7.4 mg/L).[3]

Five mothers who were taking oral efavirenz 600 mg daily as part of an antiretroviral regimen collected mid-feed milk samples at 0.5, 1, 2, 4, 8, 12 and 24 hours after an evening dose at an average of 146 days after delivery. The average peak level of 4.5 mg/L occurred at about 4 hours after the dose and the average trough milk value was 2.5 mg/L.[4]

One hundred thirty-four mothers who were taking efavirenz 600 mg at bedtime as part of their antiretroviral regimen and their infants were studied. In the first part of the study, women were separated into noncarriers, homozygotes and homozygotes for the CYP2B6 516TT gene. Random breastmilk concentrations had median values of 1610, 2370 and 4070 mcg/L in the three groups, respectively. A pooled subset of 29 mothers underwent extensive sampling of plasma and breastmilk sampling, encompassing 203 paired maternal plasma and breastmilk levels. In these mothers the median peak breastmilk levels were 4020 4540 and 8920 mcg/L, respectively. Corresponding trough milk levels were 1120, 1500, and 2480 mcg/L. The authors estimated that the average dosages that infants would receive would be 344 mcg/kg, 379 mcg/kg and 1340 mcg/kg daily in the maternal noncarrier, heterozygous and homozygous groups, respectively.[5] A physiologically based pharmacokinetic model was created by the authors and compared to the 29 pooled patients’ data. Over 80% of observed data points were within the model’s predictive interval.[6] Another model based on data from this study found that the simulated average milk concentrations were 2.31 mg/L, 2.89 mg/L and 4.63 mg/L from CYP2B6 516GG, GT, and TT mothers, respectively. These translated to average daily infant dosages of 0.35, 0.43, and 0.69 mg/kg, respectively.[7]

Women in Malawi received the option B+ regimen for prevention of mother-to-child transmission of HIV consisting of tenofovir, lamivudine and efavirenz between 6 and 8 pm daily. The efavirenz dose was not stated, but was presumably 600 mg daily. Milk samples collected in the morning from 33 women at month 1 postpartum had a median efavirenz concentration of 1.6 mg/L (IQR 0.86 to 2.3 mg/L). Milk samples collected in the morning from 47 women at month 12 postpartum had a median efavirenz concentration of 1.8 mg/L (IQR 1.0 to 4.3 mg/L).[8]

Mother-infant pairs were studied among mothers taking efavirenz 600 mg daily as part of a multi-drug HIV regimen. Mothers hand-express milk samples 12 to 14 hours after a morning dose at 1, 3 and 6 months postpartum. Median breastmilk efavirenz concentrations at 1, 3, and 6 months were 4.66 mg/L (n = 22) , 4.16 mg/L (n = 31) and 3.92 mg/L (n = 30), respectively. The weight-adjusted infant dosage was calculated to be 2.46% at 6 months.[9]

One mother taking efavirenz 600 mg once daily provided 3 milk samples at a median of 18.5 hours after a dose. The median drug concentration in milk was 2701 mcg/L, which resulted in an estimated infant dosage of 0.41 mg/kg daily and a relative infant dose of 1.35% of the maternal weight-adjusted dosage.[10]

Infant Levels. Thirteen mothers who averaged 15.8 weeks (range 6 to 25 weeks) postpartum were treated with efavirenz 600 mg daily plus lamivudine and zidovudine (n = 12) or stavudine (n = 1). Plasma samples were taken from their breastfed infants 3 to 4 hours after the last dose. Infant plasma concentrations averaged 0.86 mg/L (range 0.4 to 1.5 mg/L). Infant plasma concentrations averaged 13% of maternal plasma concentrations, but there was no statistically significant correlation between them. Average plasma levels were slightly below the plasma level considered effective for suppression of HIV in adults.[3]

Efavirenz was measured in 117 breastfed (90% exclusive) infants whose mothers were taking efavirenz for HIV infection during pregnancy and postpartum. All infants had detectable efavirenz in their plasma samples at 0 (mean 1.7 mg/L), 8 (mean 0.3 mg/L) and 12 (mean 0.3 mg/L) weeks postpartum. All infants had detectable efavirenz in their hair samples at 12 weeks postpartum at a mean concentration of 1.9 mcg/gram of hair (range 0.34 to 11 mcg/gram). The authors interpreted the results to mean that infants receive substantial exposure to efavirenz during breastfeeding.[11]

One hundred thirty-four mothers who were taking efavirenz 600 mg at bedtime as part of their antiretroviral regimen and their infants were studied. In the first part of the study, women were separated into noncarriers, homozygotes and homozygotes for the CYP2B6 516TT gene. Random infant serum concentrations had median values of 124, 164, and 333 mcg/L in the three groups, respectively. A subset of mothers and infants underwent extensive sampling of plasma and breastmilk sampling. In these infants, median plasma levels were 166, 89 and 293 mcg/L at 2 hours after the maternal dose and 134, 86 and 342 mcg/L at 8 hours after the maternal dose, respectively.[5]

Blood samples were taken from 25 breastfed infants of mothers who were receiving option B+ regimen for prevention of mother-to-child transmission of HIV consisting of tenofovir, lamivudine and efavirenz between 6 and 8 pm daily. The efavirenz dose was not stated, but was presumably 600 mg daily. The median morning infant plasma concentration of efavirenz at 6 months of age was 86.4 mcg/L (IQR 0 to 329 mcg/L). The median morning infant plasma concentration of efavirenz at 12 months of age was 0 mcg/L.[8]

Mother-infant pairs were studied among mothers taking efavirenz 600 mg daily as part of a multi-drug HIV regimen. Infants were breastfed (extent not stated) and plasma concentrations were measured postpartum. Median plasma efavirenz concentrations at 1, 3, and 6 months were 347 mcg/L (n = 22), 268 mcg/L (n = 30), and 175 mcg/L (n = 17), respectively. These plasma concentrations ranged from 4.8% to 7.2% of simultaneous maternal plasma levels.[9]

An infant was breastfed by a mother taking efavirenz 600 mg once daily, although the extent of breastfeeding was not sated. The infant’s serum concentration taken 17 hours after maternal drug intake at 1 month of age was 267 mcg/L.[10]

### Effects in Breastfed Infants

Thirteen mothers nursed their infants while they were taking efavirenz 600 mg daily, lamivudine 150 mg and zidovudine 300 mg daily (n = 12) or stavudine 60 mg daily (n = 1) . No adverse reactions were reported in the infants after 6 months of breastfeeding, none had developed HIV infection and all were developing normally.[3]

An unblinded study in Uganda compared the outcomes of breastfed infants and their HIV-positive mothers who were randomized to receive antiretroviral therapy that was based either on efavirenz 600 mg once daily or lopinavir 400 mg plus ritonavir 100 mg twice daily during breastfeeding. All mothers received lamivudine 150 mg, zidovudine 300 mg twice daily and trimethoprim-sulfamethoxazole once daily. All infants received prophylaxis with either zidovudine for 1 week or nevirapine for 6 weeks, plus trimethoprim-sulfamethoxazole from 6 weeks of age to 6 weeks after weaning. Almost all of the infants were exclusively breastfed until 6 months of age and about 73% were partially breastfed until 12 months of age. There was no statistical difference in hospitalizations or adverse events including anemia, neutropenia or deaths among infants in the two groups.[12]

Among 32 breastfed (extent not stated) infants whose mothers were taking efavirenz 600 mg daily as part of a multi-drug treatment for HIV infection, no adverse effects were noted by investigators or reported by mothers at 1, 3 and 6 months of age.[9]

A prospective cohort study in Malawi compared the infants of HIV+ mothers taking efavirenz and tenofovir disoproxil fumarate (n = 260) to infants of mothers who were HIV negative (n = 125). Infants were followed for growth and development for up to 18 months at which time there were 169 mother-infant pairs in the treatment group and 54 in the HIV-negative group. No difference was found in the growth and development of the breastfed infants of treated women compared to the infants of untreated mothers.[13]

An open-label, controlled, multicenter phase 3 trial women who were confirmed HIV-positive were randomized to receive one of 3 regimens: dolutegravir, emtricitabine, and tenofovir alafenamide (n = 208); dolutegravir, emtricitabine, and tenofovir disoproxil fumarate (n = 202); or efavirenz, emtricitabine, and tenofovir disoproxil fumarate (n = 207). The regimens were started at 14 to 28 weeks of pregnancy and continued postpartum. Of the 617 liveborn infants, 99% were breastfeeding at time of last infant HIV test, which was as late as 50 weeks of age. The mean infant duration on the study was 47.6 weeks of age. Infants who had any clinical or laboratory adverse event of grade 3 or higher ranged from 25 to 31%, but was not statistically significant between groups. Dolutegravir-containing regimens resulted in lower rates of virological failure, HIV drug resistance, and infant mortality up to 50 weeks postpartum compared with efavirenz, emtricitabine, and tenofovir disoproxil fumarate.[14]

### Effects on Lactation and Breastmilk

Gynecomastia has been reported among men and at least one woman receiving efavirenz therapy.[15,16] Efavirenz appears to be much more likely to cause gynecomastia than other antiretroviral agents. Gynecomastia is unilateral initially, but can progress to bilateral. Spontaneous resolution usually occurred within one year, even with continuation of the regimen. The relevance of these findings to nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021. https://www.who.int/publications/i/item/9789240031593
2 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024. https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
3 Schneider S, Peltier A, Gras A, et al. Efavirenz in human breast milk, mothers', and newborns' plasma. J Acquir Immune Defic Syndr 2008;48:450-4.18614925
4 Olagunju A, Bolaji OO, Amara A, et al. Development, validation and clinical application of a novel method for the quantification of efavirenz in dried breast milk spots using LC-MS/MS. J Antimicrob Chemother 2015;70:555-61.25326089
5 Olagunju A, Bolaji O, Amara A, et al. Breast milk pharmacokinetics of efavirenz and breastfed infants' exposure in genetically defined subgroups of mother-infant pairs: An observational study. Clin Infect Dis 2015;61:453-63.25882300
6 Olagunju A, R Rajoli, Atoyebi S, et al. Physiologically-based pharmacokinetic modelling of infant exposure to efavirenz through breastfeeding AAS Open Research 2018;1. doi:10.12688/aasopenres.12860.1
7 Pan X, Rowland Yeo K. Physiologically based pharmacokinetic modelling to determine the impact of CYP2B6 genotype on efavirenz exposure in children, mothers and breastfeeding infants. Clin Pharmacol Ther 2023;114:182-91.37078251
8 Palombi L, Pirillo MF, Marchei E, et al. Concentrations of tenofovir, lamivudine and efavirenz in mothers and children enrolled under the Option B-Plus approach in Malawi. J Antimicrob Chemother 2016;71:1027-30.26679247
9 Oumar AA, Bagayoko-Maiga K, Bahachimi A, et al. Efavirenz and lopinavir levels in HIV-infected women and their nursing infants, in Mali. J Pharmacol Exp Ther 2018;366:479-84.29986950
10 Aebi-Popp K, Kahlert CR, Crisinel PA, et al. Transfer of antiretroviral drugs into breastmilk: A prospective study from the Swiss Mother and Child HIV Cohort Study. J Antimicrob Chemother 2022;77:3436-42.36177836
11 Gandhi M, Mwesigwa J, Aweeka F, et al. Hair and plasma data show that lopinavir, ritonavir, and efavirenz all transfer from mother to infant in utero, but only efavirenz transfers via breastfeeding. J Acquir Immune Defic Syndr 2013;63:578-84.24135775
12 Cohan D, Natureeba P, Koss CA, et al. Efficacy and safety of lopinavir/ritonavir versus efavirenz-based antiretroviral therapy in HIV-infected pregnant Ugandan women. AIDS 2015;29:183-91.25426808
13 Kapito-Tembo AP, Bauleni A, Wesevich A, et al. Growth and neurodevelopment outcomes in HIV, tenofovir and efavirenz exposed breastfed infants in PMTCT Option B+ program in Malawi. J Acquir Immune Defic Syndr 2021;86:81-90.33027153
14 Chinula L, Ziemba L, Brummel S, et al. Efficacy and safety of three antiretroviral therapy regimens started in pregnancy up to 50 weeks post partum: A multicentre, open-label, randomised, controlled, phase 3 trial. Lancet HIV 2023;10:e363-e374.37167996
15 Jover F, Cuadrado JM, Roig P, et al. Efavirenz-associated gynecomastia: report of five cases and review of the literature. Breast J 2004;10:244-6.15125753
16 Rahim S, Ortiz O, Maslow M, et al. A case-control study of gynecomastia in HIV-1-infected patients receiving HAART. AIDS Read 2004;14:23-4, 29-32, 35-40.14959701

## Substance Identification

### Substance Name

Efavirenz

### CAS Registry Number

154635-17-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

Reverse Transcriptase Inhibitors